# Mexiletine

CASRN: 31828-71-4

## Drug Levels and Effects

### Summary of Use during Lactation

Maternal doses of mexiletine up to 600 mg daily produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A woman taking mexiletine 200 mg orally every 8 hours had milk levels measured during the first 4.5 days postpartum. The highest peak milk mexiletine level was 959 mcg/L and the lowest trough milk level was about 310 mcg/L.[1]

One woman taking mexiletine 200 mg orally three times daily had milk mexiletine levels of 600 and 900 mcg/L at unspecified times after doses at 2 and 6 weeks postpartum.[2]

Data from these two cases indicate that the dosage that the maximum dosage the infant receives from breastmilk is less than 2% of the mother's weight-adjusted dosage.

A woman who was nursing her 9-month-old infant was given mexiletine 200 mg three times daily for seven doses. Five milk samples were obtained over an 8-hour period, just before a dose and 2, 4, 6 and 8 hours after the dose. The trough sample had a mexiletine concentration of 1.06 mg/L, the peak was 1.9 mg/L at 2 hours after the dose, and an 8-hour sample had 1.24 mg/L. Following a second pregnancy, at 3 months postpartum, 7 breast milk samples were collected over an 8-hour period, just before the seventh dose of 200 mg and 1, 2, 3, 4, 6, and 8 hours after the dose. The trough level was 0.89 mg/L, the peak of 2.82 mg/L occurred at 1 hour after the dose, and the 8-hour level was 0.96 mg/L. The relative infant dose of the infants were 1.4% and 2.6% of the mother’s weight-adjusted dosage, although the first infant was only about 50% breastfed. If it had been fully breastfed, the relative infant dose would have been 2.8%. Additionally, the authors estimated that the infants would receive 2.7% and 5.1% of the starting infant dose of mexiletine.[3]

Infant Levels. One woman taking mexiletine 200 mg orally three times daily. Her breastfed infant's serum levels were undetectable (<50 mcg/L) at unspecified times after doses at 2 and 6 weeks postpartum.[2]

### Effects in Breastfed Infants

Failure to thrive in a 17-day-old breastfed infant may possibly have been caused by maternal use of mexiletine or atenolol (or both). The authors felt that mexiletine was unlikely to have caused the problem.[4]

A mother breastfed two infants after two pregnancies. The first infant was exposed to mexiletine for only 3 days at 9 months of age and was about 50% breastfed. The second infant was exposed to mexiletine in milk for 3 days at 3 months of age. All maternal dosages were 200 mg three times daily. No adverse effect was observed during sampling in either child. No adverse effect was observed by the mother when the first 2-year-old child was breastfed three to five times a day starting at 10 months while she was taking mexiletine.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Lewis AM, Patel L, Johnston A, et al. Mexiletine in human blood and breast milk. Postgrad Med J 1981;57:546-7 7329891
2 Timmis AD, Jackson G, Holt DW. Mexiletine for control of ventricular dysrhythmias in pregnancy. Lancet 1980;2(8195 pt 1):647-8 6107439
3 Monfort A, Morin C, Jutras M, et al. Transfer of mexiletine into breast milk: A case report. Breastfeed Med 2023;18:489-93 37184533
4 Lownes HE, Ives TJ. Mexiletine use in pregnancy and lactation. Am J Obstet Gynecol 1987;157:446-7 3618696

## Substance Identification

### Substance Name

Mexiletine

### CAS Registry Number

31828-71-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics